# Prademagene Zamikeracel

CASRN: 2088280-15-1

## Drug Levels and Effects

### Summary of Use during Lactation

There are no reports of breastfeeding after prademagene zamikeracel therapy. If the mother requires prademagene zamikeracel therapy, it is not necessarily a reason to discontinue breastfeeding. However, the benefits of breastfeeding to the mother and infant should be considered along with potential adverse effects on the breastfed infant from prademagene zamikeracel, such as potential retroviral vector-mediated insertional oncogenesis.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Prademagene Zamikeracel

### CAS Registry Number

2088280-15-1

### Drug Class

Breast Feeding

Lactation

Milk, Human

Immunotherapy, Adoptive

Antineoplastic Agents

Genetic Therapy